# Salicylic Acid

CASRN: 69-72-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of salicylic acid on the skin during breastfeeding. Because it is unlikely to be appreciably absorbed or appear in breastmilk, it is considered safe to use during breastfeeding.[1] Avoid application to areas of the body that might come in direct contact with the infant's skin or where the drug might be ingested by the infant via licking.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Lee KC, Korgavkar K, Dufresne RG, et al. (2013). Safety of cosmetic dermatologic procedures during pregnancy. Dermatol Surg.

## Substance Identification

### Substance Name

Salicylic Acid

### CAS Registry Number

69-72-7

### Drug Class

Breast Feeding

Lactation

Dermatologic Agents

Anti-Infective Agents

Antifungal Agents

Keratolytic Agents